# Pasireotide

CASRN: 396091-73-9

## Drug Levels and Effects

### Summary of Use during Lactation

The excretion of pasireotide into breastmilk has not been studied. However, because it has a high molecular weight of 1047 daltons it is likely to be poorly excreted into breastmilk and it is a peptide that is likely digested in the infant's gastrointestinal tract. It is unlikely to reach the clinically important levels in infant serum. However, the manufacturer states that nursing mothers should not use pasireotide. An alternate drug is preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Octreotide

## Substance Identification

### Substance Name

Pasireotide

### CAS Registry Number

396091-73-9

### Drug Class

Breastfeeding

Lactation

Milk, Human

Hormones

Somatostatin Analogs and Derivatives